# Spirulina

## Drug Levels and Effects

### Summary of Use during Lactation

Spirulina (Aphanizomenon sp., Spirulina sp., and others) is a fresh-water blue-green alga that contains various nutrients such as protein, B vitamins, vitamin E, chlorophyll, beta-carotene, and iron. Spirulina has no specific lactation-related uses. No data exist on the excretion of any components of spirulina into breastmilk or on the safety and efficacy of spirulina in nursing mothers or infants. Spirulina is generally well tolerated when grown under controlled conditions. Minor adverse effects include diarrhea, bloating, upset stomach, flatulence, edema, headache, muscle pain, facial flushing, and sweating. Products that are grown in uncontrolled conditions can contain heavy metals and other contaminants. Some products can be contaminated with the blue-green algae species Microcystis aeruginosa, which produces the hepatotoxins called microcystins. Breastmilk discoloration, green in one case, has been reported.[1,2]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Three days before delivery, a mother replaced her normal iron supplement with blue-green algae complex (blue-green algae, chlorella, and spirulina; Ambrosia-SupHerb Ltd., Israel) 750 mg once daily. On the second day after delivery she expressed 30 mL of dark green milk. No abnormal milk cytology was found and a microbiologic culture was negative. After stopping the supplement, her milk returned to a normal color over the next 3 days. The change in color was probably caused by the algae supplement.[2]

### References

1 Marles RJ, Barrett ML, Barnes J, et al. (2011). United States Pharmacopeia safety evaluation of spirulina. Crit Rev Food Sci Nutr.
2 Naor N, Fridman E, Kouadio F, et al. (2019). Green breast milk following ingestion of blue-green algae: A case report. Breastfeed Med.

## Substance Identification

### Substance Name

Spirulina

### Scientific Name

Arthrospira platensis Arthrospira maxima

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal